# Dolutegravir

CASRN: 1051375-16-6

## Drug Levels and Effects

### Summary of Use during Lactation

Dolutegravir is detectable in maternal milk in low amounts. It appears that elimination by newborn infants is prolonged, and the drug has been detected in infant plasma during breastfeeding. Dolutegravir has been used safely in HIV-positive mothers during breastfeeding and is recommended as a first-line drug during breastfeeding. Achieving and maintaining viral suppression with antiretroviral therapy decreases breastfeeding transmission risk to less than 1%, but not zero. Individuals with HIV who are on antiretroviral therapy with a sustained undetectable viral load and who choose to breastfeed should be supported in this decision. If a viral load is not suppressed, banked pasteurized donor milk or formula is recommended.[1,2]

### Drug Levels

Maternal Levels. An HIV-positive mother took a combination tablet containing dolutegravir 50 mg, abacavir sulfate 600 mg and lamivudine 300 mg (Triumeq) once daily. Her breastmilk dolutegravir concentrations were measured periodically over a 10-month period and averaged about 100 mcg/L at 11 hours after the dose. The authors estimated a daily infant dosage of 15 mcg/kg of dolutegravir.[3]

Two HIV-positive women taking dolutegravir (dose not stated, but presumably 50 mg daily) plus 2 unspecified nonnucleoside reverse transcriptase inhibitors donated two milk samples each. At 2 weeks postpartum, steady-state breastmilk dolutegravir levels in one woman were 154.2 mcg/L at 4 hours after the dose and 40.9 mcg/L at 24 hours after a dose. In the other woman, steady-state breastmilk dolutegravir levels were 116.3 mcg/L at 3 hours after the dose and 17.7 mcg/L at 24 hours after a dose. At 2 and 9 days, respectively, after discontinuing the drug, breastmilk levels were undetectable (<10 mcg/L).[4]

Twenty-eight pregnant HIV-positive women were randomized to receive an antiretroviral regimen containing oral dolutegravir 50 mg once daily. Of these, 17 women underwent extensive postpartum sampling of breastmilk and maternal serum at a median of 10 days postpartum. Median dolutegravir peak concentration in milk was 84.6 mcg/L and minimum of 22.3 mcg/L. Only one woman had 14 mcg/L of dolutegravir in milk at 48 hours; all other milk samples at 48, 72 and 96 hours after drug discontinuation were negative for dolutegravir.[5] Data from this study were used to create a pharmacokinetic model of dolutegravir into milk. Using the model, the average concentration of dolutegravir in breastmilk over 24 hours was 0.05 mg/L (range 0.029-0.10 mg/L), corresponding to an absolute infant dose of 2.2 mcg/kg daily. This corresponds to a weight-adjusted infant dosage of 0.27% of the maternal dose.[6]

Three mothers taking dolutegravir 50 mg once daily provided 6 milk samples at a median of 15 hours after a dose. The median drug concentration in milk was 107 mcg/L, which resulted in an estimated infant dosage of 20 mcg/kg daily and a relative infant dose of 1% of the maternal weight-adjusted dosage.[7]

A physiologically based pharmacokinetic model was constructed for dolutegravir and compared to data from a study conducted in Uganda in nursing mothers. The model reasonably predicted maternal levels and the predicted exposure in breastfed neonates and infants was 1.28-and 2-fold higher in UGT1A1 poor metabolizers(PMs) with PM mothers compared to extensive metabolizers (EMs) with EM mothers, but remained 51-and108-fold lower than that observed in the lactating mothers, respectively.[8]

A new method of determination of dolutegravir in milk was used to detect the drug in milk samples from 10 individuals prescribed dolutegravir collected at various times. Dolutegravir was quantifiable in 9 of the samples, with concentrations ranging from 466 mcg/L to 2013 mcg/L. One sample collected 24 days after discontinuation of dolutegravir was unquantifiable.[9]

In a retrospective study in a German hospital of mothers who were receiving antiretroviral prophylaxis, one mother was receiving dolutegravir 50 mg once daily. Breastmilk levels obtained at unspecified times with respect to the dose at 1, 4, and 6 months postpartum were <50 mcg/L, 648 mcg/L and 680 mcg/L, respectively.[10]

Women in a 9-country clinical trial were randomly assigned to receive either dolutegravir 50 mg once daily with a fixed-dose combination of emtricitabine 200 mcg plus tenofovir alafenamide 25 mg once daily, or dolutegravir 50 mg once daily with a fixed-dose combination of emtricitabine 200 mg plus tenofovir disoproxil fumarate 300 mg once daily. One milk sample was obtained at 6 weeks postpartum (n = 180). The median concentrations in breastmilk was 91 mcg/L (IQR 67 to 123 mcg/L). The median RID of dolutegravir was estimated to be 1.92% (range 0.00 to 4.89%).[11]

Infant Levels. An HIV-positive mother took a combination tablet containing dolutegravir 50 mg, abacavir sulfate 600 mg and lamivudine 300 mg (Triumeq) once daily. Her infant had a plasma dolutegravir concentration of 100 mcg/L during the period of exclusive breastfeeding up to about 30 weeks postpartum. As supplemental feeding was introduced, the plasma concentrations dropped to about 30 mcg/L at 35 weeks, and to 0 with no breastfeeding after about 50 weeks postpartum.[3]

Two HIV-positive women taking dolutegravir (dose not stated, but presumably 50 mg daily) plus 2 unspecified nonnucleoside reverse transcriptase inhibitors breastfed their infants (extent not stated, but presumably exclusively). At 2 weeks postpartum, the plasma levels in one infant were 67.8 mcg/L and 75.5 mcg/L at 4 and 24 hours after the maternal dose, respectively. Two days after drug discontinuation, the infant had a plasma level of 58.6 mcg/L at a time when the maternal plasma level was 103.8 mcg/L. In the other infant, the plasma level was 16.3 mcg/L at 24 hours after the maternal dose.[4]

Seventeen women were receiving oral dolutegravir 50 mg daily as part of a study. Their breastfed infants had serum levels obtained at a median of 10 days postpartum. Their median dolutegravir peak serum concentration was 66.7 mcg/L and minimum was 60.9 mcg/L. After discontinuation of maternal dolutegravir, detectable concentrations were noted in 100%, 80% and 80% of breastfed infants at 48, 72 and 96 hours following final maternal dose, respectively. The ratio of paired maternal and infant serum concentrations was 0.03 at the peak and 0.08 at the trough.[5]

Twenty-one breastfed infants whose mothers were receiving dolutegravir postpartum had a total of 65 serum concentration measured postpartum. Infant serum concentrations were 4.9% of maternal plasma concentration in the first 24 hours after the final maternal dose, increasing to 11% of maternal plasma concentration when measured over the 96 hours after the final maternal dose. The increase indicates a slower drug elimination in infants compared to their mothers.[6]

Two infants were breastfed by mothers taking dolutegravir 50 mg once daily, although the extent of breastfeeding was not sated. Infant serum concentrations taken at 1 month of age were 279 mcg/L at 15 hours after the dose in one infant and 100 mcg/L at 13 hours after the dose in the other.[7]

A physiologically based pharmacokinetic computer model was developed to simulate infant exposure to dolutegravir from the milk of Black African mothers. The model predicted that with a maternal dosage of 50 mg daily, the infant dose would be 0.008 mg/kg daily with a maximum relative infant dosage of less than 2%, including infants who were uridine diphosphate-glucuronosyltransferase 1A1 (UGT1A) poor metabolizers. This dosage was predicted to result in a peak serum level in breastfed neonatal plasma of 55.1 mcg/L (range 21 to 125 mcg/L).[12]

In a retrospective study in a German hospital, two mothers who were receiving dolutegravir 50 mg once daily breastfed their infants. Infant serum concentrations obtained at unspecified times in one of the infants was 5780 mcg/L at 4 months of age with exclusive breastfeeding and 4040 mcg/L at 6 months of age with partial breastfeeding. The second infant who was partially breastfed had serum levels of <50 mcg/L at 1 and 4 months of age.[10]

Women in a 9-country clinical trial were randomly assigned to receive either dolutegravir 50 mg once daily with a fixed-dose combination of emtricitabine 200 mcg plus tenofovir alafenamide 25 mg once daily, or dolutegravir 50 mg once daily with a fixed-dose combination of emtricitabine 200 mg plus tenofovir disoproxil fumarate 300 mg once daily. One infant blood sample was obtained at 6 weeks postpartum (n = 180). The median concentration in infant plasma was 69 mcg/L (IQR 41 to 9569 mcg/L).[11]

### Effects in Breastfed Infants

An HIV-positive mother took a combination tablet containing dolutegravir 50 mg, abacavir sulfate 600 mg and lamivudine 300 mg (Triumeq) once daily. Her infant was exclusively breastfed for about 30 weeks and partially breastfed for about 20 weeks more. No obvious side effects were noted.[3]

In a study of African women with HIV infection received a dolutegravir-based regimen of 50 mg dolutegravir, 300 mg tenofovir disoproxil fumarate, and either 200 mg emtricitabine in South Africa or 300 mg lamivudine in Uganda during pregnancy and breastfeeding. This regimen was as safe for breastfed as an efavirenz-based regimen with the same other drugs.[13]

An open-label, controlled, multicenter phase 3 trial women who were confirmed HIV-positive were randomized to receive one of 3 regimens: dolutegravir, emtricitabine, and tenofovir alafenamide (n = 208); dolutegravir, emtricitabine, and tenofovir disoproxil fumarate (n = 202); or efavirenz, emtricitabine, and tenofovir disoproxil fumarate (n = 207). The regimens were started at 14 to 28 weeks of pregnancy and continued postpartum. Of the 617 liveborn infants, 99% were breastfeeding at time of last infant HIV test, which was as late as 50 weeks of age. The mean infant duration on the study was 47.6 weeks of age. Infants who had any clinical or laboratory adverse event of grade 3 or higher ranged from 25 to 31%, but was not statistically significant between groups. Dolutegravir-containing regimens resulted in lower rates of virological failure, HIV drug resistance, and infant mortality up to 50 weeks postpartum compared with efavirenz, emtricitabine, and tenofovir disoproxil fumarate.[14]

A woman with newly diagnosed HIV infection began dolutegravir 50 mg and lamivudine 300 mg daily at week 23 of pregnancy. She breastfed (extent not stated) her infant who remained HIV-negative after 10 month of breastfeeding and had normal growth- and neurological development.[15]

A study in rural Tanzania compared HIV-uninfected children born to women living with HIV on dolutegravir- and efavirenz-based antiretroviral regimens. Exclusive breastfeeding was reported in 945 of 1002 (94%) infants shortly after birth, and 340 of 579 (59%) at 6 months. At 12 months, 436 of 488 (89%) infants had complementary feeding. The study found no evidence of a difference in length-for-age or weight-for-length z-scores through 18 months of follow-up between the groups. HIV-exposed, but uninfected, infants have poorer growth outcomes compared to children not exposed to HIV. Although dolutegravir causes weight gain in adults it appears to have limited impact on birthweight and growth in infants from mothers on dolutegravir-based regimens during pregnancy and breastfeeding compared to regimens not containing dolutegravir.[16]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Raltegravir

### References

1 Department of Health and Human Services. Recommendations for the use of antiretroviral drugs during pregnancy and interventions to reduce perinatal HIV transmission in the United States. 2024 https://clinicalinfo.hiv.gov/sites/default/files/guidelines/documents/perinatal-hiv/guidelines-perinatal.pdf
2 World Health Organization. Consolidated guidelines on HIV prevention, testing, treatment, service delivery and monitoring: Recommendations for a public health approach. 2021 https://www.who.int/publications/i/item/9789240031593
3 Kobbe R, Schalkwijk S, Dunay G, et al. Dolutegravir in breast milk and maternal and infant plasma during breastfeeding. AIDS 2016;30:2731–3.27782968
4 Gini J, Penchala SD, Amara A, et al. Validation and clinical application of a novel LC-MS method for quantification of dolutegravir in breast milk. Bioanalysis 2018;10:1933–45.30450920
5 Waitt C, Orrell C, Walimbwa S, et al. Safety and pharmacokinetics of dolutegravir in pregnant mothers with HIV infection and their neonates: A randomised trial (DolPHIN-1 study). PLoS Med 2019;16:e1002895.31539371
6 Dickinson L, Walimbwa S, Singh Y, et al. Infant exposure to dolutegravir through placental and breastmilk transfer: A population pharmacokinetic analysis of DolPHIN-1. Clin Infect Dis 2021;73:e1200–e7.33346335
7 Aebi-Popp K, Kahlert CR, Crisinel PA, et al. Transfer of antiretroviral drugs into breastmilk: A prospective study from the Swiss Mother and Child HIV Cohort Study. J Antimicrob Chemother 2022;77:3436–42.36177836
8 Ning J, Rowland-Yeo K, Pansari A, et al. Application of PBPK to supplement clinical data and investigate the impact of UGT1A1 phenotype on dolutegravir exposure in African breastfed infants. Clin Pharmacol Ther 2024;115:S101–S2. doi:10.1002/cpt.3167
9 Rackow AR, Pandey A, Price AL, et al. Rapid and sensitive liquid chromatographic–tandem mass spectrometric methods for the quantitation of dolutegravir in human plasma and breast milk. J Mass Spectrom Adv Clin Lab 2024;34:1–7.39429949
10 Spielberger BD, Zink A, Rohr JC, et al. Breastfeeding on ART and a closer look at drug transfer to HIV-exposed uninfected infants. Sci Rep 2025;15:32612.40968165
11 Nguyen T, Chae JW, Ziemba L, et al. Breast milk transfer and infant exposures to dolutegravir, tenofovir, and tenofovir alafenamide: Results from IMPAACT 2010/VESTED. J Acquir Immune Defic Syndr 2026;101:296–301.41195894
12 Ning J, Pansari A, Rowland Yeo K, et al. Using PBPK modeling to supplement clinical data and support the safe and effective use of dolutegravir in pregnant and lactating women. CPT Pharmacometrics Syst Pharmacol 2024;13:1924–38.39478302
13 Malaba TR, Nakatudde I, Kintu K, et al. 72 weeks post-partum follow-up of dolutegravir versus efavirenz initiated in late pregnancy (DolPHIN-2): An open-label, randomised controlled study. Lancet HIV 2022;9:e534–e43.35905752
14 Chinula L, Ziemba L, Brummel S, et al. Efficacy and safety of three antiretroviral therapy regimens started in pregnancy up to 50 weeks post partum: A multicentre, open-label, randomised, controlled, phase 3 trial. Lancet HIV 2023;10:e363–e74.37167996
15 Rohr I, Hoeltzenbein M, Weizsäcker K, et al. Efficacy and safety of 2-drug regime dolutegravir/lamivudine in pregnancy and breastfeeding - clinical implications and perspectives. J Perinat Med 2024;52:934–8.39288277
16 Glanzmann S, Luoga E, Okuma J, et al. The impact of dolutegravir on the growth of HIV-exposed uninfected infants: An observational cohort study in rural Tanzania. EClinicalMedicine 2026;96:103984.42256685

## Substance Identification

### Substance Name

Dolutegravir

### CAS Registry Number

1051375-16-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents

Anti-HIV Agents

Anti-Retroviral Agents

HIV Integrase Inhibitors